# Dinoprostone

CASRN: 363-24-6

## Drug Levels and Effects

### Summary of Use during Lactation

Dinoprostone (prostaglandin E2) has not been measured in human milk after exogenous administration, but it is a normal component of breastmilk in small amounts where it may help protect the infant's gastrointestinal tract.

Use of vaginal dinoprostone to induce labor appears to have a negative effect on breastfeeding. Given orally in the first few days postpartum, dinoprostone can suppress lactation. Whether postpartum vaginal or endocervical administration suppresses lactation is not known, but it should probably not be used postpartum in mothers who wish to breastfeed. By one month postpartum, the drug appears not to suppress lactation.

### Drug Levels

Maternal Levels. Milk levels of dinoprostone have not been measured after exogenous administration to humans. However, it is a normal component of breastmilk, where it may play a role in protecting the infant's gastrointestinal tract.[1-7] Normal concentrations in milk vary widely over a range up to about 500 ng/L, but appear to be similar to the maternal plasma concentrations.[5]

Vaginal or endocervical administration of dinoprostone for induction of labor produces maternal serum concentrations about double the normal levels, so milk concentrations are likely to be comparably higher following exogenous administration.[8,9]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A retrospective cohort study of birth records in Cardiff, Wales, UK found that the use of vaginal prostaglandins for the induction of labor resulted in an 11% decrease in the likelihood that mothers would be breastfeeding at 48 hours postpartum. The subgroup of first-time mothers had a 15% decrease.[10]

A nonrandomized prospective study compared women who had spontaneous deliveries with those who had elective induction using dinoprostone vaginal gel. At hospital discharge, exclusive breastfeeding rates were similar between the two groups (88% and 89%). However, at 1 and 3 months postpartum, exclusive breastfeeding rates were significantly lower in mothers who had dinoprostone induction than in those who delivered spontaneously. Exclusive breastfeeding rates were 54% and 85% at 1 month and 46% and 59% at 3 months postpartum, respectively. Rates of supplemental and exclusive formula feeding were higher in the induced mothers at both time points also.[11]

Dinoprostone has been used investigationally to inhibit postpartum lactation and engorgement by reducing serum prolactin concentrations.[12-16] The effect on prolactin levels, engorgement and lactation appears to be dose and duration related. Oral dosages of 3 mg daily for 4 days or 0.5 mg three times daily were ineffective,[16,17] whereas oral dosages of 8 to 12 mg over 24 to 30 hours were effective.[12,14] These effects seem to be limited to the first few days postpartum; dinoprostone had no effect on serum prolactin or milk production when given to women 30 days postpartum.[12] Compared to oral bromocriptine 2.5 mg every 12 hours for 14 days, dinoprostone 12 mg orally in divided doses over 30 hours was as effective as bromocriptine, but resulted in less rebound breast tenderness.[14]

### References

1 Lucas A, Mitchell MD. Prostaglandins in human milk. Arch Dis Child 1980;55:950-2.7458394
2 Neu J, Wu-Wang CY, Measel CP, et al. Prostaglandin concentrations in human milk. Am J Clin Nutr 1988;47:649-52.3162635
3 Hawkes JS, Bryan DL, James MJ, et al. Cytokines (Il-1beta, Il-6, TNF-alpha, TGF-beta1, and TGF-beta2) and prostaglandin E2 in human milk during the first three months postpartum. Pediatr Res 1999;46:194-9.10447115
4 Le Deist F, De Saint-Basile G, Angeles-Cano E, et al. Prostaglandin E2 and plasminogen activators in human milk and their secretion by milk macrophages. Am J Reprod Immunol Microbiol 1986;11:6-10.3461715
5 Shimizu T, Yamashiro Y, Yabuta K. Prostaglandin E1, E2, and F2 alpha in human milk and plasma. Biol Neonate 1992;61:222-5.1610950
6 Alzina V, Puig M, de Echaniz L, et al. Prostaglandins in human milk. Biol Neonate 1986;50:200-4.3465374
7 Reid B, Smith H, Friedman Z. Prostaglandin in human milk. Pediatrics 1980;66:870-2.7454478
8 Goharkhay N, Stanczyk FZ, Gentzschein E, et al. Plasma prostaglandin E(2) metabolite levels during labor induction with a sustained-release prostaglandin E(2) vaginal insert. J Soc Gynecol Investig 2000;7:338-42.11111068
9 Siqueira M, Neves J, Arteaga M, et al. [Plasma prostaglandin E2 in pregnant women undergoing labor induction with endocervical gel application]. Rev Esp Med Nucl 1999;18:268-71.10481108
10 Jordan S, Emery S, Watkins A, et al. Associations of drugs routinely given in labour with breastfeeding at 48 hours: Analysis of the Cardiff births survey. BJOG 2009;116:1622-9.19735379
11 Zanardo V, Bertin M, Sansone L, et al. The adaptive psychological changes of elective induction of labor in breastfeeding women. Early Hum Dev 2016;104:13-6.27914274
12 Caminiti F, De Murtas M, Parodo G, et al. Decrease in human plasma prolactin levels by oral prostaglandin E2 in early puerperium. J Endocrinol 1980;87:333-7.7452120
13 Beric B, Mitreski A, Kuzmancev O, et al. [Inhibition of initial puerperal and postpartum lactation using oral prostaglandin E2 (dinoprostone)]. Med Pregl 1992;45:421-6.1344441
14 England MJ, Tjallinks A, Hofmeyr J, et al. Suppression of lactation. A comparison of bromocriptine and prostaglandin E2. J Reprod Med 1988;33:630-2.3172062
15 Nasi A, de Murtas M, Parodo G, et al. Inhibition of lactation by prostaglandin E2. Obstet Gynecol Surv 1979;35:619-20.7413116
16 Grunberger W. [Postpartum uterus involution and lactation levels in randomized comparison between prostin E2 tablets and methergine dragees]. Gynakol Rundsch 1983;23:100-7.6347832
17 Tulandi T, Gelfand MM, Maiolo LM. Effect of prostaglandin E2 on puerperal breast discomfort and prolactin secretion. J Reprod Med 1985;30:176-8.3858547

## Substance Identification

### Substance Name

Dinoprostone

### CAS Registry Number

363-24-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Oxytocics

Prostaglandins